# Iptacopan

CASRN: 1644670-37-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of iptacopan during breastfeeding. The manufacturer states that breastfeeding should be discontinued during treatment and for 5 days after the final dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Iptacopan

### CAS Registry Number

1644670-37-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complement Inactivating Agents